# Flupenthixol

CASRN: 2709-56-0; 53772-82-0

## Drug Levels and Effects

### Summary of Use during Lactation

Flupenthixol (flupentixol) is not approved for marketing in the United States by the U.S. Food and Drug Administration, but is available in other countries. Limited information indicates that maternal oral doses of up to 4 mg daily or depot injections of 40 mg every 2 weeks produced low levels in milk and breastfed infants' serum, and caused no adverse developmental consequences. A safety scoring system finds flupenthixol possible to use cautiously during breastfeeding.[1] Until more data are available, flupenthixol should be used with careful infant monitoring during breastfeeding.

### Drug Levels

Maternal Levels. Three women received the cis isomer of flupenthixol, cis-(z)-flupenthixol, during pregnancy and nursing; 2 of the women were receiving a depot injection. Milk cis-(z)-flupenthixol concentrations on days 4 and 41 postpartum from the woman receiving 40 mg every 2 weeks were 0.8 and 1.8 mcg/L, respectively. Milk cis-(z)-flupenthixol concentrations on day 17 postpartum from the woman receiving 60 mg every 3 weeks was 1.8 mcg/L. In the mother taking 2 mg of cis-(z)-flupenthixol orally every day, a milk concentration on day 30 postpartum was 1.8 mcg/L; however, the collection time was not stated.[2]

One woman received flupenthixol during pregnancy and postpartum. She took a daily oral dose of 1 mg of flupenthixol during pregnancy and 4 mg daily starting on the first day postpartum. Milk samples were taken 7 times over 36 hours on days 6 and 7 postpartum. The highest milk flupenthixol level of 6.8 mcg/L occurred 4.5 hours after the dose, and the average of the milk levels was 2.8 mcg/L. Milk flupenthixol levels measured on day 20 postpartum at 2 hours after the dose averaged 2.2 mcg/L with a maternal dose of 3 mg daily. On day 48 postpartum, flupenthixol was undetectable (<2 mcg/L) in milk 3.5 hours after a maternal dosage of 2 mg daily. Milk levels taken after feeding were much higher than those taken before feeding, probably because of higher concentrations in the more fat-rich hindmilk. The authors estimated that an exclusively breastfed infant would receive 0.4 mcg/kg daily or 0.6% of the maternal weight-adjusted dosage.[3]

Infant Levels. A woman took flupenthixol 1 mg and nortriptyline 100 mg daily during pregnancy and flupenthixol 4 mg and nortriptyline 125 mg daily immediately postpartum. Her exclusively breastfed infant had flupenthixol serum concentrations of <0.2 mcg/L and <0.3 mcg/L on days 6 and 7 postpartum, respectively.[3]

### Effects in Breastfed Infants

A woman took flupenthixol 1 mg and nortriptyline 100 mg daily during pregnancy and flupenthixol 4 mg and nortriptyline 125 mg daily immediately postpartum. She exclusively breastfed her infant. Over a 4-month period, the infant showed no signs of adverse drug effects and had normal motor development with a maternal dosage of flupenthixol 2 mg daily and nortriptyline 75 mg daily.[3]

### Effects on Lactation and Breastmilk

Flupenthixol can increase serum prolactin and has caused galactorrhea.[4-8] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

Haloperidol, Olanzapine, Quetiapine, Risperidone

### References

1 Uguz F. A new safety scoring system for the use of psychotropic drugs during lactation. Am J Ther 2021;28:e118-e26.30601177
2 Kirk L, Jørgensen A. Concentrations of cis(Z)-flupentixol in maternal serum, amniotic fluid, umbilical cord serum, and milk. Psychopharmacology (Berl) 1980;72:107-8.6781000
3 Matheson I, Skjaeraasen J. Milk concentrations of flupenthixol, nortriptyline and zuclopenthixol and between-breast differences in two patients. Eur J Clin Pharmacol 1988;35:217-20.3191943
4 Trimble MR, Robertson MM. Flupenthixol in depression. A study of serum levels and prolactin response. J Affect Disord 1983;5:81-9.6220047
5 Bostwick JR, Guthrie SK, Ellingrod VL. Antipsychotic-induced hyperprolactinemia. Pharmacotherapy 2009;29:64-73.19113797
6 Jørgensen A, Andersen J, Bjørndal N, et al. Serum concentrations of cis(Z)-flupentixol and prolactin in chronic schizophrenic patients treated with flupentixol and cis(Z)-flupentixol decanoate. Psychopharmacology (Berl) 1982;77:58-65.6812119
7 Kropp S, Ziegenbein M, Grohmann R, et al. Galactorrhea due to psychotropic drugs. Pharmacopsychiatry 2004;37 (Suppl 1):S84-8.15052519
8 Sun HG, He LQ, Liu LB. A case of pseudo prolactin elevation caused by medication. Clin Lab 2025;71.39967525

## Substance Identification

### Substance Name

Flupenthixol

### CAS Registry Number

2709-56-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antipsychotic Agents

Dopamine Antagonists